# Antivenin Micrurus Fulvius

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of antivenin Micrurus fulvius (coral snake antivenin) during breastfeeding. Because it is a mixture of large protein molecules, the amounts in milk are likely to be very low.[1] They are also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Antivenin Micrurus Fulvius

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Antivenins